# Valerian

CASRN: 8008-88-6; 8057-49-6

## Drug Levels and Effects

### Summary of Use during Lactation

Valerian (Valeriana officinalis) root contains mono- and sesquiterpenes, and iridoid triesters (valepotriates). Preparations are sometimes standardized on valerenic acid content. Valerian has no specific uses in nursing mothers, but is most commonly used to treat anxiety and sleep disturbances, and occasionally for self-treatment of postpartum blues or depression.[1,2] No data exist on the safety and efficacy of valerian in nursing mothers or infants. In general, valerian is well tolerated, with side effects such as dizziness, hangover or headache reported occasionally. Valerian is "generally recognized as safe" (GRAS) for use in food by the U.S. Food and Drug Administration. Valerian is often not recommended during lactation because of the theoretical concerns over its valepotriates and baldrinals which have been shown to be cytotoxic and mutagenic in vitro. Because there is no published experience with valerian during breastfeeding, an alternate therapy may be preferred, especially while nursing a newborn or preterm infant.

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements is available elsewhere on the LactMed Web site.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Anxiety) Lorazepam, Oxazepam; (Depression) Nortriptyline, Paroxetine, Sertraline; (Insomnia) Zaleplon, Zolpidem

### References

1 Allaire AD, Moos MK, Wells SR. (2000). Complementary and alternative medicine in pregnancy: A survey of North Carolina certified nurse-midwives. Obstet Gynecol.
2 Tesch BJ. (2003). Herbs commonly used by women: An evidence-based review. Am J Obstet Gynecol.

## Substance Identification

### Substance Name

Valerian

### Scientific Name

Valeriana officinalis

### CAS Registry Number

8008-88-6; 8057-49-6

### Drug Class

Breast Feeding

Lactation

Complementary Therapies

Phytotherapy

Plants, Medicinal